# Ubrogepant

CASRN: 1374248-77-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ubrogepant during breastfeeding. However, amounts in breastmilk are low and virtually absent from milk 16 hours after a dose. Ubrogepant is not expected to cause any adverse effects in breastfed infants. If ubrogepant is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred while nursing a newborn or preterm infant. Some experts recommend withholding breastfeeding for 8 to 12 hours after a dose.[1]

### Drug Levels

Maternal Levels. Twelve lactating women who were 1 to 6 months postpartum received a single dose of 100 mg of ubrogepant orally. Breastmilk was expressed completely from both breasts using an electric pump and collected at 0 to 2, 2 to 4, 4 to 8, 8 to 12, 12 to 16, and 16 to 24 hours after the dose. The peak concentration in milk was 384 mcg/L in the 0 to 2 hour sample, which was designated as 1 hour. The concentrations of ubrogepant in breast milk were <1 mcg/L in the collection at 16 to 24 hours after the dose in 10 of the 12 participants. The cumulative amount of ubrogepant recovered in breast milk over 24 hour after the dose was 0.014 mg and the mean relative infant dose was 0.15%.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Topiramate, Valproic Acid; (Migraine Treatment) Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Ornello R, Maassen van den Brink A, Puledda F, et al. Migraine management during pregnancy, breastfeeding and in women planning pregnancy. Cephalalgia 2025;45:3331024251393945.41263702
2 Boinpally RR, Smith JH, Cohen E, et al. Milk and plasma pharmacokinetics of single-dose ubrogepant in healthy lactating women. Headache 2025;65:1190–7.40391560

## Substance Identification

### Substance Name

Ubrogepant

### CAS Registry Number

1374248-77-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Calcitonin Gene Related Peptide Receptor Antagonists

CGRP-R Inhibitors